# Hops

## Drug Levels and Effects

### Summary of Use during Lactation

Hops (Humulus lupulus) contains bitter acids, flavonoids, phytoestrogens (e.g., 8-prenylnaringenin), and essential oil. Hops is a purported galactogogue.[1] Some animal evidence indicates that a polysaccharide in hops can increase serum prolactin.[2] However, a small study in humans found that a hops soup appeared to lower serum prolactin levels.[3] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[4,5] No data exist on the excretion of any components of hops into breastmilk or on the safety and efficacy of hops in nursing mothers or infants. Hops is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration. Hops can cause sedation and should be avoided while taking other sedating drugs and in patients with depression. Allergy to hops occurs rarely. Some sources recommend avoiding hops during breastfeeding because of its phytoestrogen content.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Studies in animals indicate that a polysaccharide found in barley and hops is apparently responsible for an increase in prolactin after beer ingestion.[2,6] Refer to the LactMed record on Alcohol for details.

A soup of hops was tested for its effect on serum prolactin in three groups of subjects. The soup consisted of 100 to 200 grams of hops, cooked over low heat, and taken in 3 to 4 portions per day. In 5 healthy males, prolactin was measured before and after the soup twice, at 8 am and 3 am. At 8 am, prolactin was unchanged after the soup. At 3 am, serum prolactin averaged 43.4 mcg/L before the soup and 15.4 mcg/L after the soup. In healthy women who took a dose of metoclopramide, the hops soup blunted the metoclopramide-induced prolactin increase at 1 and 3 hours after the dose. In 6 women with galactorrhea, peak serum prolactin was unchanged before and after metoclopramide when hops soup was taken.[3]

### References

1 Ayers JF. (2000). The use of alternative therapies in the support of breastfeeding. J Hum Lact.
2 Sawagado L, Houdebine LM. (1988). Identification of the lactogenic compound present in beer. Ann Biol Clin (Paris).
3 Kuang AK. (1984). Zhong Xi Yi Jie He Za Zhi.
4 Brodribb W. ABM Clinical Protocol #9. (2018). Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med.
5 (2021). Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol.
6 Koletzko B, Lehner F. (2000). Beer and breastfeeding. Adv Exp Med Biol.

## Substance Identification

### Substance Name

Hops

### Scientific Name

Humulus lupulus

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal